# Azathioprine

CASRN: 446-86-6

## Drug Levels and Effects

### Summary of Use during Lactation

Studies in women with inflammatory bowel disease, systemic lupus erythematosus or transplantation taking doses of azathioprine up to 200 mg daily for immunosuppression have found either low or unmeasurable levels of the active metabolites in milk and infant serum. Some evidence indicates a lack of adverse effects on the health and development of infants exposed to azathioprine during breastfeeding up to 4.6 years of age, but long-term follow-up for effects such as carcinogenesis have not been performed. Azathioprine has been extensively used by nursing mothers and numerous experts and professional guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[1-7]

Mothers with decreased activity of the enzyme that detoxifies azathioprine metabolites may transmit higher levels of drug to their infants in breastmilk. Poorly documented cases of mild, asymptomatic neutropenia and increased rates of infection have been reported occasionally. It might be desirable to monitor exclusively breastfed infants with a complete blood count with differential, and liver function tests if azathioprine is used during lactation, although some authors feel that monitoring is unnecessary.[8] Avoiding breastfeeding for 4 hours after a dose should markedly decrease the dose received by the infant in breastmilk.[9]

### Drug Levels

Azathioprine is rapidly metabolized to the active metabolite mercaptopurine which is further metabolized to active metabolites including 6-methylmercaptopurine, thioguanine, 6-thioguanine nucleosides (6-TGNs), 6-methylmercaptopurine, and 6-methylmercaptopurine nucleosides (6-MMPNs). The enzyme thiopurine methyltransferase (TPMT) is responsible for metabolism of 6-TGNs. Deficiencies in this enzyme can lead to excessive toxicity.

Maternal Levels. Mercaptopurine milk levels were measured in 2 patients receiving azathioprine following renal transplantation. In one mother who was 2 days postpartum, peak colostrum levels occurred 2 and 8 hours after a 75 mg oral dose and were 3.4 and 4.5 mcg/L, respectively. In the other mother who was 7 days postpartum, a peak mercaptopurine milk level of 18 mcg/L occurred 2 hours after a 25 mg oral dose.[10] The milk levels of these 2 mothers correspond to 0.05% and 0.6% of the maternal weight-adjusted dosages, respectively. Infant serum levels were not measured.

Four women receiving an immunomodulator to treat inflammatory bowel disease had metabolite levels measured in milk during the first 6 weeks postpartum. The abstract does not mention the specific drug and dose being taken, but the azathioprine metabolites 6-methylmercaptopurine (6-MMP) and 6-TGNs were measured. Although therapeutic levels were found in maternal serum, 6-MMP (<650 mcg/L) and 6-TGNs were undetectable (<123 mcg/L) in milk (time of collection not stated).[11]

A case series described 2 mothers who took 100 mg azathioprine daily while breastfeeding. Each mother collected milk samples over a 24-hour period, 5 and 6 samples, respectively. Mercaptopurine was undetectable (<5 mcg/L) in all samples. The authors estimated that the maximum dose of mercaptopurine that a completely breastfed infant would receive would be 0.09% of the maternal weight-adjusted dosage or 0.07% of the dose given to infants following cardiac transplantation.[12]

Ten women who were taking azathioprine 75 to 150 mg daily at the time of delivery for systemic lupus erythematosus (n = 7), renal transplant (n = 2) or Crohn’s disease (n = 1) donated milk samples on days 3 to 4, 7 to 10 and 28 postpartum. Milk was collected before the single daily dose and at each breastfeed for 12 to 18 hours for a total of 31 samples. Only one woman taking azathioprine 100 mg daily had mercaptopurine detected in her milk. On day 28 postpartum, milk mercaptopurine concentrations were 1.2 mcg/L at 3 hours and 7.6 mcg/L at 6 hours after the dose.[13]

Eight lactating women who were 1.5 to 7 months postpartum were taking azathioprine in dosages ranging from 75 to 200 mg daily for inflammatory bowel disease. All of the women had wild type TPMT phenotypes. Peak mercaptopurine milk concentrations occurred within the first 4 hours after ingesting azathioprine and ranged from 2 to 50 mcg/L. By 5 hours after the dose, the milk concentrations of mercaptopurine had dropped markedly in all patients. The authors estimated that the “worst case” infant intake of mercaptopurine would 0.0075 mg/kg daily which is less than 1% of the maternal weight-adjusted dosage.[14]

Infant Levels. Four infants were breastfed (3 exclusively, 1 rarely received formula) during maternal use of azathioprine orally in dosages of 1.2 to 2.1 mg/kg daily. All of the mothers and infants had the wild type TPMT *1/*1 genotype, and all of the mothers had normal enzyme activity. At 3 to 3.5 months of age, all of the infants had undetectable blood levels of 6-TGNs and 6-MMPN.[15] The authors later updated this report to include 2 previously unreported mother-infant pairs. These infants also had undetectable blood levels of 6-TGNs and 6-MMPN.

Seven infants were breastfed during maternal intake of azathioprine in single oral doses of 75 to 150 mg daily. None had detectable mercaptopurine or thioguanine in their blood obtained between days 1 and 28 postpartum.[13]

Three infants whose mothers were taking azathioprine for inflammatory bowel disease (n = 2), or systemic lupus erythematosus (n = 1) were breastfed during maternal use of azathioprine. Azathioprine doses were 100 mg (plus prednisolone), 150 mg (plus infliximab) and 175 mg daily. In 1 infant, thioguanine was low, but detectable in blood at 3 days of age and 6-MMPN was undetectable; at 3 weeks of age, neither metabolite was detectable. In another infant, neither metabolite was detectable at 3 weeks of age. Neither assay limits nor specific maternal doses were stated in the published abstract.[16]

A woman began taking azathioprine 100 mg (1.4 mg/kg) daily for Crohn’s disease while breastfeeding (extent not stated) her 3-month-old infant. After 8 days and 3 months of maternal therapy, 6-TGNs were measured, although breastfeeding had been tapered to zero by 3 months. On both occasions, 6-TGNs were not detectable in the blood of the infant. The assay limit was not stated.[17]

### Effects in Breastfed Infants

Three infants were breastfed during long-term maternal azathioprine 75 to 100 mg daily and methylprednisolone use following renal transplantation. All three infants had no abnormal blood counts, no increased frequency of infections and above average growth rates.[10,18] The IgA levels in one mother’s breastmilk were measured and found to be normal.[10]

One infant was breastfed for 6 days after birth by a mother who was taking 75 mg of azathioprine daily in addition to cyclosporine. Nursing was interrupted for 4 days, then partial breastfeeding was reestablished. The infant showed no signs of renal or neurologic toxicity or hirsutism during long-term follow up.[19]

Twelve infants were breastfed for up to 12 months during maternal use of azathioprine 50 to 100 mg daily (6 with concomitant cyclosporine) following kidney or kidney-pancreas transplantation. Kidney function was normal in all infants when measured after breastfeeding had ceased. The growth and psychomotor development of all infants was normal.[20]

One infant was exclusively breastfed for 10.5 months during maternal use of azathioprine 100 mg daily, cyclosporine and prednisone. Partial breastfeeding continued for 2 years. The infant thrived with normal growth at 12 months. The mother also breastfed a second child while on the same drug regimen.[21]

Four infants were breastfed (3 exclusively, 1 rarely received formula) during maternal use of azathioprine orally in dosages of 1.2 to 2.1 mg/kg daily. At 3 to 3.5 months of age, all infants were healthy and were within the 50th to 95th percentiles on growth charts.[17] The authors reported 2 additional infants who received azathioprine via breastmilk with no adverse reactions detected.[22]

In another case series, 4 infants were breastfed (partially in 1 case, not stated in the others) during maternal use of azathioprine. Two mothers took 100 mg daily, 1 took 75 mg daily and 1 took 50 mg daily and partially breastfed her preterm infant. All were taking several other medications concurrently. One infant was followed up at 1 month, two at 2 months and one at 1 year of age. No adverse events were reported in any of the infants and all were growing and developing normally.[12]

Six infants whose mothers were breastfeeding and taking azathioprine were monitored monthly for the duration of their breastfeeding with blood counts and for evidence of infection. One infant developed a low blood count and breastfeeding was discontinued; the other 5 infants continued to breastfeed apparently without harm. The dosages of azathioprine, concurrent medications and the extent of breastfeeding were not reported in the brief published abstract.[23]

Ten infants, 3 preterm, were breastfed during maternal intake of azathioprine in single oral doses of 75 to 150 mg daily. No signs of immunosuppression were seen in the infants during the first 28 days postpartum. In 7 of the infants, white cell and neutrophil counts were performed between days 1 and 28 postpartum. One infant had a borderline low neutrophil count but a normal white cell count.[13]

A survey of women with autoimmune hepatitis found that 8 infants of 4 women had been breastfed (extent not stated) during maternal azathioprine use in unspecified dosages. No adverse effects were reported by the mothers.[24]

An infant was breastfed (extent not stated) from birth to the age of 3 months during maternal therapy with azathioprine 100 mg (1.4 mg/kg) daily. During the 6 months of follow-up, the infant thrived and had no infections.[17]

A nonrandomized, prospective study in Austria followed the infants of 23 women with inflammatory bowel disease who were treated in one clinic. Mothers who received azathioprine (median dose 150 mg daily; range 100 to 250 mg daily) for treatment breastfed for a median of 6 months (range 1 to 18 months) and those who did not take azathioprine breastfed for a median of 8 months (range 3.5 to 23 months). Follow-up occurred at a median of 3.3 years in the azathioprine-exposed infants (n = 15) and 4.7 years in the unexposed infants (n = 15). No differences were found in mental or physical development between the two groups of infants. More infants who were unexposed to azathioprine had more than 2 colds annually and more conjunctivitis episodes than in the unexposed group. No difference was seen in the numbers of other infections between the groups.[25]

A case series of 10 clinically well infants greater than 35 weeks of gestational age were breastfed by mothers taking azathioprine 1.2 to 1.65 mg/kg daily. Nine were breastfed starting at birth and one started breastfeeding at 4 weeks of age. One infant was mixed-fed for 6 weeks before breastfeeding was established and one mother stopped breastfeeding at 3 weeks postpartum. The total white cell and neutrophil counts of all infants remained within the normal reference ranges, except for slight transient decreases that recovered in two infants. All the infants remained clinically well during the observation period of up to 6 months of age with no signs of increased rates of infection.[26]

In The Netherlands, 30 infants of mothers taking either azathioprine (n = 28) or mercaptopurine (n = 2) for inflammatory bowel disease during pregnancy and postpartum were followed at 1 to 6 years of age using a 43-item quality of life questionnaire. Of this cohort, 9 infants were breastfed for a mean of 7 months (range 3 to 13 months) No statistically significant differences were found between breastfed and formula-fed infants in any of the 12 domains of the survey.[27]

In France, 30 infants of 29 mothers who took azathioprine 50 to 175 mg daily during pregnancy and nursed for at least 1 month (range 1 to 17 months) were followed. Three infants had low white blood cell (WBC) counts at birth that normalized during breastfeeding (extent not stated). Of 20 infants who had later WBC counts, one had mild, asymptomatic neutropenia during 1.5 months of breastfeeding that persisted for 15 days following breastfeeding discontinuation. No other adverse effects were seen during a median of 9.5 months (range 1.5 to 30 months) of follow-up.[28]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 102 women received a thiopurine (azathioprine or mercaptopurine) and another 67 received a thiopurine plus a biological agent (adalimumab, certolizumab, golimumab, infliximab, natalizumab, or ustekinumab) while breastfeeding their infants. Among those who received a thiopurine or combination therapy while breastfeeding, infant growth, development or infection rate was no different from 208 breastfed infants whose mothers received no treatment.[29]

As of December 2013, The National Transplantation Pregnancy Registry has collected information on a total of 83 mothers who had breastfed 117 infants for as long as 42 months while taking azathioprine with no apparent adverse effects in infants.[30] A more recent review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that 12 mothers with transplants had breastfed their infants for at least 4 weeks while taking azathioprine as their primary immunosuppressant and 353 had taken it as an adjunct to other immunosuppressants.[31]

A national survey of gastroenterologists in Australia identified 21 infants who were breastfed by mothers taking a combination of allopurinol and a thiopurine (e.g., azathioprine, mercaptopurine) to treat inflammatory bowel disease. All had taken the combination during pregnancy also. Two postpartum infant deaths occurred, both at 3 months of age. One was a twin (premature birth-related) and the other from SIDS. The authors did not believe the deaths were medication related.[32] No information was provided on the extent of breastfeeding, specific thiopurines, drug dosages or the outcomes of the other infants.

A mother with a liver transplant was maintained on belatacept 10 mg/kg monthly, slow-release tacrolimus (Envarsus and Veloxis) 2 mg daily, azathioprine 25 mg daily, and prednisone 2.5 mg daily. She breastfed her infant for a year (extent not stated). The infant’s growth and cognitive milestones were normal.[33]

An Australian case series reported 3 women with heart transplants who had a total of 5 infants, all of whom were breastfed (extent not stated). Two of the women took azathioprine 75 mg once daily postpartum. No adverse infant effects were reported up to the times of discharge.[34]

An infant was born at 38 weeks to a mother who was taking azathioprine, mesalamine and sulfasalazine during pregnancy for severe ulcerative colitis. On routine postnatal screening (time postpartum not specified), the infant was found to have a low B-cell kappa deleting recombination excision circles (KREC) of 15 copies/microliter. Breastfeeding was discontinued and 2 weeks later, the infant’s KREC level improved to a normal level of 355 copies/microliter, with normal CD19+ B-cell counts. It is unclear if the abnormality was caused by transplacental passage or breastmilk exposure to azathioprine or some other cause.[35]

In a cohort study, over a 10-year period 17 nursing mothers with a rheumatic disease took azathioprine during partial or exclusive breastfeeding. No mention was made of adverse effects in their infants.[36]

A retrospective study was performed on data from patients with lupus erythematosus from 10 hospitals in the United Kingdom who received or did not receive azathioprine during pregnancy and lactation. Fifty-nine infants whose mothers took azathioprine during pregnancy and/or breastfeeding and were compared to 140 infants who were not exposed. Infants were followed for a median of 4.55 years. There were statistically significantly more infections reported in infants exposed to azathioprine (24.1%) compared to non-exposed infants (13.7%). The percentage of infants who were breastfed was not stated.[37]

A single-center, retrospective study found 44 women with inflammatory bowel disease who had 62 pregnancies and 59 live births who took low-dose azathioprine in combination with allopurinol during pregnancy and postpartum. Eighty-four percent of their infants were breastfed and no serious signals or complications were reported first year of life.[38]

Following a successful uterus transplant and embryo transfer, a newborn infant was breastfed by a mother taking tacrolimus, azathioprine 150 mg (2 mg/kg), prednisone 5 mg, and enoxaparin 40 mg daily. The tacrolimus dosage was adjusted to achieve a serum concentration of 5 to 7 mcg/L. The mother breastfed (exclusively?) for 8 weeks and weaned over the next 4 weeks. At 15 months, the infant was achieving all developmental milestones.[39]

### Effects on Lactation and Breastmilk

Cases of hyperprolactinemia and galactorrhea with normal prolactin have been reported rarely in patients taking azathioprine.[40,41]

### Alternate Drugs to Consider

(Immunosuppression) Cyclosporine, Tacrolimus; (Inflammatory Bowel Disease) Budesonide, Infliximab, Mesalamine, Prednisone; (Systemic Lupus Erythematosus) Hydroxychloroquine, Prednisone

### References

1 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
2 Vestergaard C, Wollenberg A, Barbarot S, et al. European task force on atopic dermatitis position paper: treatment of parental atopic dermatitis during preconception, pregnancy and lactation period. J Eur Acad Dermatol Venereol 2019;33:1644–59.31231864
3 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
4 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
5 Laube R, Selinger CP, Seow CH, et al. Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040–53.36944479
6 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
7 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
8 Christensen LA, Dahlerup JF, Nielsen MJ, et al. Azathioprine treatment during lactation: Authors' reply. Aliment Pharmacol Ther 2009;30:91. doi:.10.1111/j.1365-2036.2009.03996.x
9 Bar-Gil Shitrit, A, Grisaru-Granovsky S, Ben Ya'acov, A, et al. Management of inflammatory bowel disease during pregnancy. Dig Dis Sci 2016;61:2194–204.27068171
10 Coulam CB, Moyer TP, Jiang NS, et al. Breast-feeding after renal transplantation. Transplant Proc 1982;14:605–9.6817481
11 Kane SV, Present DH. Metabolites to immunomodulators are not detected in breast milk. Am J Gastroenterol 2004;99 (10 Suppl. S):S246–7. doi:10.1111/j.1572-0241.2004.001_1.x
12 Moretti ME, Verjee Z, Ito S, et al. Breast-feeding during maternal use of azathioprine. Ann Pharmacother 2006;40:2269–72.17132809
13 Sau A, Clarke S, Bass J, et al. Azathioprine and breastfeeding-is it safe? BJOG 2007;114:498–501.17261122
14 Christensen LA, Dahlerup JF, Nielsen MJ, et al. Azathioprine treatment during lactation. Aliment Pharmacol Ther 2008;28:1209–13.18761704
15 Gardiner SJ, Gearry RB, Roberts RL, et al. Exposure to thiopurine drugs through breast milk is low based on metabolite concentrations in mother-infant pairs. Br J Clin Pharmacol 2006;62:453–6.16995866
16 Bernard N, Garayt C, Chol F, et al. Prospective clinical and biological follow-up of three breastfed babies from azathioprine-treated mothers. Fundam Clin Pharmacol 2007;21 (Suppl. 1):62–3. doi:10.1111/j.1472-8206.2007.00481.x
17 Zelinkova Z, De Boer IP, van Dijke MJ, et al. Azathioprine treatment during lactation. Aliment Pharmacol Ther 2009;30:90–1.19566905
18 Grekas DM, Vasiliou SS, Lazarides AN. Immunosuppressive therapy and breast-feeding after renal transplantation. Nephron 1984;37:68.6371564
19 Madill JE, Levy G, Greig P. Pregnancy and breast-feeding while receiving cyclosporine A. In: Williams B, Sandiford-Guttenbeil D, eds. Trends in organ transplantation. New York: Springer Publishing Company; 1996:109–21.
20 Nyberg G, Haljamae U, Frisenette-Fich C, et al. Breast-feeding during treatment with cyclosporine. Transplantation 1998;65:253–5.9458024
21 Muñoz-Flores-Thiagarajan KD, Easterling T, Davis C, et al. Breast-feeding by a cyclosporine-treated mother. Obstet Gynecol 2001;97:816–8.11336764
22 Gardiner SJ, Gearry RB, Roberts RL, et al. Comment: breast-feeding during maternal use of azathioprine. Ann Pharmacother 2007;41:719–20.17389671
23 Khare MM, Lott J, Currie A, et al. Is it safe to continue azathioprine in breast feeding mothers? J Obstet Gynaecol 2003;23 (Suppl 1):S48. doi:10.1080/718591746
24 Werner M, Bjornsson E, Prytz H, et al. Autoimmune hepatitis among fertile women: Strategies during pregnancy and breastfeeding? Scand J Gastroenterol 2007;42:986–91.17613929
25 Angelberger S, Reinisch W, Messerschmidt A, et al. Long-term follow-up of babies exposed to azathioprine in utero and via breastfeeding. J Crohns Colitis 2011;5:95–100.21453877
26 Singh M, Qualie J, Currie A, et al. Is breastfeeding safe with azathioprine? Obstet Med 2011;4:104–7.27579102
27 de Meij TG, Jharap B, Kneepkens CM, et al. Long-term follow-up of children exposed intrauterine to maternal thiopurine therapy during pregnancy in females with inflammatory bowel disease. Aliment Pharmacol Ther 2013;38:38–43.23675854
28 Bernard N, Gouraud A, Paret N, et al. Azathioprine and breastfeeding: Long-term follow-up. Fundam Clin Pharmacol 2013;27 (S1):12. doi:10.1111/fcp.12025
29 Matro R, Martin CF, Wolf D, et al. Exposure concentrations of infants breastfed by women receiving biologic therapies for inflammatory bowel diseases and effects of breastfeeding on infections and development. Gastroenterology 2018;155:696–704.29857090
30 Constantinescu S, Pai A, Coscia LA, et al. Breast-feeding after transplantation. Best Pract Res Clin Obstet Gynaecol 2014;28:1163–73.25271063
31 Coscia LA, Kliniewski D, Rao S, et al. Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820
32 Beswick L, Shukla D, Friedman AB, et al. National audit: Assessing the use and safety of allopurinol thiopurine co-therapy in pregnant females with inflammatory bowel disease. J Gastroenterol Hepatol 2016;31 (Suppl 2):128–9. doi:10.1111/jgh.13521
33 Klintmalm GB, Gunby RT, Jr. Successful pregnancy in a liver transplant recipient on belatacept. Liver Transpl 2020;26:1193–4.32337853
34 Boyle S, Sung-Him Mew T, Lust K, et al. Pregnancy following heart transplantation: A single centre case series and review of the literature. Heart Lung Circ 2021;30:144–53.33162367
35 Wakamatsu M, Muramatsu H, Kojima D, et al. A breast-fed baby with low KREC in TREC/KREC newborn screening whose mother received azathioprine treatment. Pediatric Blood and Cancer 2020;67 (Suppl 5):S46. doi:10.1002/pbc.28797
36 Ikram N, Eudy A, Clowse MEB. Breastfeeding in women with rheumatic diseases. Lupus Sci Med 2021;8:e000491.33832977
37 Reynolds JA, Gayed M, Khamashta MA, et al. Outcomes of children born to mothers with systemic lupus erythematosus exposed to hydroxychloroquine or azathioprine. Rheumatology (Oxford) 2022;62:1124–35.35766806
38 Sivananthan K, Wildt S, Kiszka-Kanowitz M, et al. Treatment with allopurinol and low-dose azathioprine during pregnancy in patients with Inflammatory Bowel Disease. A Danish single center experience. J Crohns Colitis 2025;19:i1828. doi:10.1093/ecco-jcc/jjae190.1158
39 Deans R, Gerstl B, Shand AW, et al. The first live term birth following uterus transplantation in Australia. Med J Aust 2025;223:404–9.40406819
40 Uygur-Bayramiçli O, Aydin D, Ak O, et al. Hyperprolactinemia caused by azathioprine. J Clin Gastroenterol 2003;36:79–80.12488716
41 Chaudhary D, Jhaj R. A case report on azathioprine-induced euprolactinemic galactorrhea. Indian J Pharmacol 2021;53:234–5.34169910

## Substance Identification

### Substance Name

Azathioprine

### CAS Registry Number

446-86-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents